# Venetoclax

CASRN: 1257044-40-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of venetoclax during breastfeeding. Because venetoclax is more than 99% bound to plasma proteins, the amount in milk is likely to be low. However, its half-life is 26 hours and it might accumulate in the infant. Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy.[1] The manufacturer recommends that breastfeeding be discontinued during vemurafenib therapy and for 1 week after the final dose. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Urbaniak C, McMillan A, Angelini M, et al. (2014). Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome.
3 Stopenski S, Aslam A, Zhang X, et al. (2017). After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible?. Breastfeed Med.

## Substance Identification

### Substance Name

Venetoclax

### CAS Registry Number

1257044-40-8

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents